# Tolcapone

CASRN: 134308-13-7

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of tolcapone during breastfeeding. An alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Tolcapone

### CAS Registry Number

134308-13-7

### Drug Class

- Breastfeeding
- Lactation
- Antiparkinson Agents
- Catechol O-Methyltransferase Inhibitors